# Bethanechol

CASRN: 674-38-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of bethanechol during breastfeeding. If it is used during breastfeeding, monitor the infant for signs of cholinergic excess (diarrhea, lacrimation, and excessive salivation or urination), especially in younger, exclusively breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release, and have variable effects on serum prolactin.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Clarke G, Fall CH, Lincoln DW, et al. (1978). Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol.
2 Müller EE, Locatelli V, Cella S, et al. (1983). Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs.

## Substance Identification

### Substance Name

Bethanechol

### CAS Registry Number

674-38-4

### Drug Class

Breast Feeding

Lactation

Muscarinic Agonists

Parasympathomimetics